# Cumin

## Drug Levels and Effects

### Summary of Use during Lactation

Cumin (Cuminum cyminum) seed contains a volatile oil that contains cuminaldehyde and other aldehydes; the seeds also contain numerous flavonoids and terpenes. Cumin has been used as a galactogogue in India, Pakistan and Türkiye with some literature support, including as part of an herbal mixture.[1-6] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[7,8] No data exist on the excretion of any components of cumin into breastmilk or on the safety and efficacy of cumin in nursing mothers or infants. Cumin is "generally recognized as safe" (GRAS) as a spice and flavoring by the U.S. Food and Drug Administration. Cumin is generally well tolerated, but occasional phototoxic skin reactions have been reported after contact with the oil. Those allergic to cumin or related herbs should avoid cumin.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 1.06 mg of eugenol. The baseline eugenol concentration in milk was 1.11 mcg/L in one sample. Eugenol was found in concentrations of 1.63 mcg/L, 1.78 mcg/L and 2.92 mcg/L in the 1 hour, 2 hour and 3 hours samples from the same mother. Eugenol was below the limit of detection in all other samples.[9]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 22 mg of cuminaldehyde, 1.1 mg of eugenol, and 35 mg of linalool. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. Cuminaldehyde reached its maximum concentration in milk after 1 hour in two participants, after 2 hours in three participants, after 3 hours in two participants, after 4 hours in three participants and after 5 hours in three participants. In ten participants, cuminaldehyde was not detected in milk. Peak milk cuminaldehyde concentrations ranged from 0.74 to 61.87 mcg/L when it waws detected. Eugenol reached its maximum concentration in milk after 1 hour in two participants, after 2 hours in two participants, after 3 hours in three participants, after 4 hours in one participant after 5 hours in two participants, after 6 hours in three participants and after 8 hours in three participants. In seven participants, eugenol was not detected in milk. Peak milk eugenol concentrations ranged from 0.29 to 11.43 mcg/L. Eugenol concentrations averaged 200% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated eugenol into milk. Linalool reached its maximum concentration in milk after 1 hour in eleven participants, after 2 hours in six, after 3 hours in two participants, while in one participant, the maximum was not clearly determinable. Peak milk linalool concentrations ranged from 4.13 to 18.91 mcg/L. Linalool concentrations averaged 40% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated linalool into milk.[10]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Women who were between 14 and 90 days postpartum and reported lactation failure were given instructions on breastfeeding technique and encouraged to exclusively breastfeed. If their infants had gained less than 15 grams in 1 week, they were randomized to receive either two tablespoonfuls of a mixture containing wild asparagus or an identical placebo for 4 weeks. In each 100 grams, the mixture contained Asparagus racemosus 15 grams, Anethum soiva 1 gram, Ipomea digitata 1 gram, Glycyrrhiza glabra 1 gram, Spinacia oleracea 2.5 grams, Cuminum cyminum 0.5 gram, and Panchatrinamol 1 gram. Of the 64 women randomized, 11 did not complete the trial. Serum prolactin measurements were made before a morning nursing before treatment, and after 4 weeks of treatment. Infant weight gains and the number of supplemental feedings were recorded initially and after 4 weeks of therapy. No differences were found in the changes in serum prolactin, infant weight gain or amount of supplementation between the treatment and placebo groups after 4 weeks of therapy. No side effects or changes in liver function tests occurred during the study.[11]

One hundred fifty-eight mothers in Iran of who reported difficulty in breastfeeding were given either a proprietary mixture of herbs (Shirafza Drop) or a chlorophyll solution as a placebo. The herbal mixture contained the purported galactogogues fennel, anise, cumin, black seed, and parsley. Infant ages ranged between 0 and 6 months and they were exclusively breastfed. Weight gain of the infants was measured over time. No difference in infant weight gain was seen between the two groups of infants.[12] Blinding and randomization in this study is unclear.

In an uncontrolled, non-blinded multicenter study in India, 1132 patients who reported inadequate milk supply were give a mixture (Lactancia, Corona Remedies Pvt. Ltd.) to take in a dose of 30 grams twice daily. The product contains Asparagus racemosus (wild asparagus, shatavari), Cuminum cyminum (cumin), Glycyrrhiza glabra (licorice), Spinacia oleracea (spinach) as well as amino acids, vitamins, minerals and DHA. Most of the mothers (1049) had improved lactation and increased infant weight.[13] However, with no placebo control group, results cannot be attributed to the product.

A blinded, triple-arm study compared the effects of cumin (Cuminum cyminum) drops, stinging nettle (Urtica dioica) drops, and placebo on several markers of lactation adequacy in healthy multiparous mothers with 10- to 15-day-old term infants. Fifteen drops of the preparations were given three times a day for 4 weeks. The method of preparation and content of the drops were not stated, but they were prepared especially for this study and not commercially available. The tastes and colors of the preparations may have compromised the blinding of the study; the placebo had no taste, but the taste and colors of the other preparations were not stated. At the end of the study, both the cumin and nettle groups had greater weight gains, higher feeding frequencies, more wet diapers, a higher weight of diapers, and more frequent defecation in the two treatment groups. Furthermore, these parameters were statistically greater in the cumin group than in the nettle group. No side effects were reported by the mothers.[14]

A commercial preparation containing wild asparagus 2 grams, dill 1.5 grams, cumin 1 gram, and cardamom 0.5 grams (Ayush-SS granules, Central Council for Research Ayurveda & Siddha, India) per dose was studied in a randomized double-blind trial in Indian mothers whose infants were experiencing “insufficient lactation”. This dose was given twice daily for 12 weeks beginning when full-term infants failed to regain their birth weight by 14 days postpartum, exhibited a weight gain of less than 20 grams daily between days 15 and 90 of life, or had fewer than six urinations per day. A per-protocol analysis (dropout rate 22%) found that at six months, 74 of 106 (70%) infants in the Ayush-SS group were exclusively breastfed, compared to 47 of 105 (45%) in the placebo group. After 90 days, 81 of 106 infants (77%) in the Ayush-SS group gained at least 20 grams per day compared to 44 of 105 (41.8%) in the placebo group. Maternal perceptions of insufficient lactation were lower in the Ayush-SS group (15% vs. 58%). All of these differences were statistically significant. No severe adverse events related to the intervention were observed.[5] The study was well designed and performed, but no intent-to-treat analysis was performed.

### References

1 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
2 Agrawala IP, Achar MVS, Boradkar RV, et al. Galactagogue action of Cuminum cyminum and Nigella sativa. Indian J Med Res 1968;56:841–4.5693882
3 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
4 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
5 Saxena U, Ota S, Rajput S, et al. Clinical evaluation of Ayush-SS granules in exclusively breastfeeding mothers with insufficient lactation: A randomized, double-blind, placebo-controlled trial. Int Breastfeed J 2025;20:26.40188102
6 Hussain K, Alshaqhaa MA, Ain N, et al. Medicinal plants used during childbirth and maternal-neonatal healthcare in Punjab, Pakistan. Res J Pharmacogn 2026;13:43–58. doi:10.22127/rjp.2026.578423.3127
7 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
8 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
9 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
10 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
11 Sharma S, Ramji S, Kumari S, et al. Randomized controlled trial of Asparagus racemosus (Shatavari) as a lactogogue in lactational inadequacy. Indian Pediatr 1996;33:675–7.8979551
12 Shariati M, Mamoori GA, Khadivzade T. The survey of effect of using "Shirafza Drop" by nursing mothers on weight gain (WG) of 0-6 months exclusively breastfed. Horizon Med Sci 2004;10:24–30. http://imtj.gmu.ac.ir/article-1-255-en.html
13 Mehta A. Efficacy of amino acids, vitamins, minerals, docosahexaenoic acid, galactagogue combination on lactation: A postmarketing surveillance study. J S Afr Fed Obstet Gynecol 2014;6:118–22. doi:10.5005/jp-journals-10006-1287
14 Farshad F, Sahebzad ES, Kheirkhah M, et al. Comparison of the effect of Cumin cyminum and nettle oral drops on the breast milk sufficiency indicators in new mothers. Sultan Qaboos Univ Med J 2024;24:209–15.38828245

## Substance Identification

### Substance Name

Cumin

### Scientific Name

Cuminum cyminum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal